# Primidone

CASRN: 125-33-7

## Drug Levels and Effects

### Summary of Use during Lactation

Ample evidence exists that primidone taken during nursing can affect the breastfed infant. Infant serum levels of primidone and its metabolites are often near or in the therapeutic range and symptoms of sedation and poor nursing have been reported. On the other hand, infants exposed in utero sometimes have withdrawal symptoms that are either alleviated by breastfeeding or worsened when breastfeeding is abruptly stopped. If the mother requires primidone, it is not a reason to discontinue breastfeeding. However, the infant must be monitored for sedation, poor feeding, poor weight gain., and developmental milestones, especially in younger, exclusively breastfed infants and when using combinations of anticonvulsant drugs. Measurement of an infant serum level might help rule out toxicity if there is a concern.

### Drug Levels

Primidone is metabolized to phenobarbital and phenylethylmalonamide (PEMA) which have sedating and anticonvulsant properties. In published reports of anticonvulsant use during breastfeeding, most women were taking a combination of anticonvulsants. Some other anticonvulsants (e.g., phenytoin, carbamazepine) stimulate the metabolism of other drugs including anticonvulsants, whereas others (e.g., valproic acid) inhibit the metabolism of other drugs. Therefore, the relationship of the maternal dosage to the concentration in breastmilk can be quite variable, making calculation of the weight-adjusted percentage of maternal dosage less meaningful than for other drugs in this database.

Maternal Levels. An epileptic mother was taking primidone 250 mg 3 times daily and valproic acid 2.4 grams daily during pregnancy and postpartum. During the second week postpartum, a breastmilk primidone level was 6 mg/L, which was 50% of her serum level. Primidone metabolites were not measured.[1]

Twelve primidone breastmilk levels were measured between days 3 and 32 postpartum at unstated times after the dose in an unstated number of women who were taking primidone and other anticonvulsants in unstated dosages. Primidone levels averaged 2.3 mg/L (range 0.8 to 2.8 mg/L), while maternal serum levels averaged 2.8 mg/L.[2]

An epileptic woman was taking primidone 1 gram daily and carbamazepine 1 gram daily during pregnancy and postpartum. At 5 weeks postpartum, a milk sample was measured. The milk fat contained 11 mg/L while the skimmed portion contained 9.1 mg/L of primidone. At the same time, phenobarbital levels in milk fat and skimmed milk were 11.2 and 11.4 mg/L, respectively.[3]

Four mothers taking an average dosage of 7.3 mg/kg daily of primidone had breastmilk levels measured of primidone and its metabolites at various times during days 4 to 27 days postpartum. One of the mothers was also taking valproic acid. Average milk levels were as follows: primidone 4.2 mg/L, PEMA 2 mg/L, and phenobarbital 2.8 mg/L. One mother also had 3 hydroxyphenobarbital levels averaging 0.3 mg/L reported.[4] Using the total of all the drug and metabolite levels, an exclusively breastfed infant would receive an average of 18.5% of the maternal-weight-adjusted dosage.

A woman with epilepsy was taking primidone 250 mg twice daily had milk primidone levels ranging from 15 to 36 micromoles/L (3.3 to 7.9 mg/L). When her dose was doubled to 500 mg twice daily, her milk primidone levels were 40 to 78 micromoles/L (8.7 to 17 mg/L).[5]

Infant Levels. An infant whose epileptic mother was taking primidone 625 mg, phenobarbital 100 mg, phenytoin 200 mg and sulthiame 200 mg daily during pregnancy and postpartum was partially breastfed. At 17 days of age, the phenobarbital serum level was 2 mg/L. The proportion of breastfeeding was increased, and at 1 month of age, the infant's serum phenobarbital level was 12.7 mg/L. Breastfeeding continued, but by 2 months of age, the serum phenobarbital concentration was 1 mg/L.[6]

A woman with epilepsy was taking primidone 250 mg twice daily. Her breastfed infant had serum primidone levels ranging from 2 to 3 micromoles/L (0.44 to 0.66 mg/L). When the mother’s dose was doubled to 500 mg twice daily, the infant’s primidone levels were 8 to 9 micromoles/L (1.75 to 1.96 mg/L).[5]

The mother of a fully breastfed infant was taking primidone 825 mg daily at birth; dosage was decreased in steps to 625 mg daily at 14 days postpartum and then to 325 mg daily at 1 month of age. The infant's steady-state levels were primidone 2.5 mg/L, PEMA 1.4 mg/L and phenobarbital 10 mg/L during this time. Another mother taking primidone 500 mg daily during pregnancy and breastfeeding. The infant's steady-state levels were primidone 0.7 mg/L, PEMA 0.4 mg/L and phenobarbital 2 mg/L during the first 30 days postpartum.[7]

In a series of 9 mothers who were taking primidone (dosages not reported) during the first week postpartum, the average milk level was 8.4 mg/L (range 5.2 to 13.7 mg/L) which averaged 115% (range 44 to 228%) of their serum levels. Five of the mothers had phenobarbital levels milk levels measured. Milk levels averaged 6.6 mg/L or 37% of their serum levels.[8]

### Effects in Breastfed Infants

An infant death occurred from overlying and suffocation by a parent during sleep. Sedation from primidone, phenobarbital and phenytoin in breastmilk was possibly a contributing factor. Phenobarbital was found in the infant's serum (8 mg/L) and liver (16 mcg/gram) on autopsy.[9]

A mother with epilepsy was taking primidone 250 mg 3 times daily and valproic acid 2.4 g daily during pregnancy and postpartum. During the second week postpartum, her breastfed infant was sedated. Breastfeeding was stopped and the drowsiness cleared.[1] The sedation was possibly caused by primidone in breastmilk.

A woman taking primidone 1 gram daily and carbamazepine 1 gram daily during pregnancy and postpartum breastfed her infant for 5 weeks and noted no difference in the infant's activity before and after nursing.[3]

A probable case of drug-induced drowsiness occurred in a newborn whose mother was taking primidone, carbamazepine and phenytoin (dosages not stated). At day 30, breastfeeding was discontinued because of the drowsiness that occurred after each feeding and poor weight gain. These authors also found that 15 partially breastfed infants whose mothers were taking anticonvulsants, including primidone, gained weight at a slower rate during the first 5 days postpartum than did 75 infants of epileptic mothers who bottle fed or control mothers taking no medications.[10]

Possible drug-related drowsiness, pallor and feeding difficulties were reported in a 4-day-old whose mother was taking primidone 625 mg, phenobarbital 100 mg, phenytoin 200 mg and sulthiame 200 mg daily during pregnancy and postpartum. Nasogastric feeding was required for 5 weeks, during with time the infant continued to be partially breastfed.[6]

In a cohort study of women who were taking primidone during pregnancy and their infants, 7 infants had withdrawal symptoms after birth. Of these infants, one was partially breastfed and the rest were not breastfed. In contrast, five infants who were breastfed did not have withdrawal symptoms.[7]

Sedation lasting 5 weeks after birth and a lack of weight gain for 4 weeks after birth were reported in the exclusively breastfed infant of a mother who was taking primidone 11.4 mg/kg daily, valproic acid 13.6 mg/kg daily, and ethosuximide 11.4 mg/kg daily during pregnancy and postpartum.[11] The reaction was possibly caused by primidone in breastmilk.

A mother with epilepsy was taking primidone 250 mg twice daily and nursing her infant. When her dose was doubled to 500 mg twice daily, a decrease in nursing was attributed to the drug in breastmilk.[5]

A breastfed infant whose mother was taking primidone 375 mg, phenobarbital 90 mg, and carbamazepine 800 mg daily did well despite a saliva phenobarbital level of 3.4 mg/L. At 7 months of age, after the mother abruptly stop nursing, the infant had a number of "startle reactions" and infantile seizures occurred which were confirmed by an abnormal electroencephalogram. Continued phenobarbital administration to the infant for 15 months controlled the seizures and no more occurred up to 5 years of age.[12]

A woman with long-standing seizure disorder was taking primidone and levetiracetam became pregnant. The dosage of her medications were reduced during pregnancy to provide a primidone (phenobarbital) serum concentration of 3.4 mg/L and a levetiracetam serum concentration of 40.5 mg/L. The mother was instructed to discontinue breastfeeding after 3 days. The following day her infant developed withdrawal seizures. After reinstituting breastfeeding, the infant's seizures stopped and did not recur. The infant had no abnormal findings and was thriving and seizure free at 6 months of age.[13]

### Effects on Lactation and Breastmilk

No direct effect is known, but mothers taking antiepileptic drugs stop breastfeeding earlier and supplement more than mothers not taking antiepileptic drugs. Most of these reports occurred in older studies in which sedating agents such as phenobarbital and primidone were used. Infant sucking difficulties and sedation were reasons given for the reduced nursing.[10,14]

### Alternate Drugs to Consider

(Seizure Disorder) Carbamazepine, Divalproex, Gabapentin, Lamotrigine, Oxcarbazepine, Phenytoin, Valproic Acid

### References

1 Espir ML, Benton P, Will E, et al. Sodium valproate (Epilim) - some clinical and pharmacological aspects. In: Legg N, ed. Clinical and pharmacological aspects of sodium valproate in the treatment of epilepsy: Proceedings of a symposium. Turnbridge Wells, England: MCS Consultants; 1976:145-51.
2 Kaneko S, Sato T, Suzuki K. The levels of anticonvulsants in breast milk. Br J Clin Pharmacol 1979;7:624-7.465285
3 Niebyl JR, Blake DA, Freeman JM, et al. Carbamazepine levels in pregnancy and lactation. Obstet Gynecol 1979;53:139-40.760015
4 Nau H, Rating D, Hauser I, et al. Placental transfer at birth and postnatal elimination of primidone and metabolites in neonates of epileptic mothers. In: Janz D, Bossi L, Dam M, et al., eds. Epilepsy, pregnancy and the child. New York: Raven Press; 1982:361-6.
5 Söderman P, Elwin CE, Liden A. Excretion in mllk and blood levels of primidone and phenobarbital in mother and child during primidone treatment. Acta Pharmacol Toxicol (Copenh) 1986;59 (Suppl 5 Pt 2):183.
6 Granström ML, Bardy AH, Hiilesmaa VK. Prolonged feeding difficulties of infants of primidone mothers during neonatal period: Preliminary results from the Helsinki study. In: Janz D, Bossi L, Dam M, et al., eds. Epilepsy, pregnancy and the child. New York: Raven Press; 1982:357-8.
7 Kuhnz W, Koch S, Helge H, et al. Primidone and phenobarbital during lactation period in epileptic women: Total and free drug serum levels in the nursed infants and their effects on neonatal behavior. Dev Pharmacol Ther 1988;11:147-54.3383727
8 Meyer FP, Quednow B, Potrafki A, et al. The perinatal pharmacokinetics of anticonvulsant drugs. Zentralbl Gynakol 1988;110:1195-205.3239295
9 Juul S. Barbiturate poisoning via breast milk? Ugeskr Laeger 1969;131:2257-8.5372729
10 Kaneko S, Suzuki K, Sato T, et al. The problems of antiepileptic medication in the neonatal period: Is breast-feeding advisable? In, Janz D, Dam M, Richens A et al. Epilepsy, pregnancy and the child New York Raven Press 1982:343-8.
11 Kuhnz W, Koch S, Jacob S, et al. Ethosuximide in epileptic women during pregnancy and lactation period. Placental transfer, serum concentration in nursed infants. Br J Clin Pharmacol 1984;18:671-7.6508976
12 Knott C, Reynolds F, Clayden G. Infantile spasms on weaning from breast milk containing anticonvulsants. Lancet 1987;330:272-3.2886736
13 Rauchenzauner M, Kiechl-Kohlendorfer U, Rostasy K, et al. Old and new antiepileptic drugs during pregnancy and lactation - report of a case. Epilepsy Behav 2011;20:719-20.21444249
14 Hartmann AM, Koch S, Jager-Roman E, et al. Breast feeding, weight gain and behaviour in newborns of epileptic women. Monatsschr Kinderheilkd 1994;142:505-12.

## Substance Identification

### Substance Name

Primidone

### CAS Registry Number

125-33-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticonvulsants

Barbiturates